# Eculizumab

CASRN: 219685-50-4

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal dosages of eculizumab usually produce undetectable levels in breastmilk. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[1] No adverse effects attributable to eculizumab have been reported in infants who were breastfed during maternal therapy. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[2]

### Drug Levels

Maternal Levels. Two women began treatment with eculizumab for paroxysmal nocturnal hemoglobinuria during pregnancy and continued receiving the drug postpartum while breastfeeding their infants. Serum and breastmilk samples were obtained at 12 hours and 5 days after their last dose. Eculizumab was not detectable (assay limit not specified) in breastmilk despite therapeutic serum concentrations.[3]

A woman treated with eculizumab 900 mg twice weekly for paroxysmal nocturnal hemoglobinuria during pregnancy had her breastmilk tested for the presence of the drug. She received a dose one day after delivery. A milk sample one day later had detectable eculizumab, but in an amount less than 35 mg/L. Eight more breastmilk samples taken up to 12 days postpartum and 13 days after the postpartum dose had no detectable eculizumab.[4]

Twenty-five women were identified who were taking eculizumab for paroxysmal nocturnal hemoglobinuria during breastfeeding. Ten of the women receiving unstated dosages of the drug had a breastmilk sample tested for eculizumab, which was undetectable (<5 mg/L) in all samples.[5]

A woman with paroxysmal nocturnal hemoglobinuria was found to be pregnant at 20 weeks of gestation. She was treated with eculizumab 900 mg weekly starting at 30 weeks of gestation and then 1200 mg every 2 weeks beginning at 34 weeks of gestation. The drug was continued at this dosage throughout the pregnancy and for 3 months postpartum. The patient delivered at 36 weeks of gestation and eculizumab was undetectable (assay limit not specified) in breastmilk at that time.[6] The time between the last dose and measurement of milk levels was not stated.

Three cases of Japanese women treated for paroxysmal nocturnal hemoglobinuria reportedly were given eculizumab during pregnancy and postpartum. The dosage was 900 mg every 2 weeks in two cases and unstated in the third. Eculizumab was undetectable (assay limit not specified) in breastmilk in all cases, apparently at the time of delivery.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two women began treatment with eculizumab during pregnancy and continued receiving the drug postpartum while breastfeeding their infants. One infant had no complications up to 30 weeks of follow-up. The other infant developed neutropenia up to 12 weeks of age, but it was not attributed to eculizumab.[3]

A group of authors associated with the manufacturer of the drug reported that 25 patients had breastfed while taking eculizumab for paroxysmal nocturnal hemoglobinuria. Infant outcomes were not stated.[5]

One center reported a cohort of 14 women who received eculizumab for paroxysmal nocturnal hemoglobinuria during pregnancy. Ten of the infants were breastfed (extent not stated) with no reported complications.[8,9]

A mother with paroxysmal nocturnal hemoglobinuria became pregnant while on eculizumab and continued the drug during pregnancy and lactation. During the third trimester and immediately postpartum she was receiving 1200 mg weekly. One month postpartum, her dosage was decreased to 900 mg every 2 weeks. She continued to breastfeed her baby for six months (extent not stated). At 3 months and one year of age, the infant was developing normally for her age.[10,11]

Academic and manufacturer personnel analyzed the manufacturer’s pharmacovigilance database. There were 31 reports of mothers breastfeeding their infants during eculizumab therapy, 20 patients with paroxysmal nocturnal hemoglobinuria and 11 patients with atypical hemolytic uremic syndrome. Neither dosages nor extent of breastfeeding were reported, and some of the cases might have been reported elsewhere previously. None of the breastfed infants had any adverse effects.[12]

One center reported their experience with women who received eculizumab for hemolytic-uremic syndrome. Four of the women became pregnant and subsequently breastfed their infants (extent and duration not stated). No long-term complications were seen in the infants.[13]

A woman with neuromyelitis optica spectrum disorder was receiving eculizumab, tacrolimus and prednisolone in unspecified dosages. Two years and 3 months after starting eculizumab, she conceived and delivered a healthy fullterm infant. At 6 months postpartum, the infant was reported to have no developmental problems.[14]

A woman with both paroxysmal nocturnal hemoglobinuria and hereditary protein C deficiency was treated during pregnancy and postpartum with eculizumab, with a postpartum dose of 900 mg every 2 weeks. She breastfed her infant (extent not stated) with no reported complications.[15]

A woman diagnosed with myasthenia gravis received eculizumab during pregnancy and continued receiving it in an unspecified dose every 2 weeks postpartum. She breastfed her infant (extent not stated) for “a few months”. At the 6-month follow-up, the infant’s height and weight were found to be in the 50th percentile, and systemic and neurological examinations were normal.[16]

A woman with paroxysmal nocturnal hemoglobinuria was taking eculizumab during pregnancy and postpartum. Postpartum she was receiving a dose of 900 mg every 2 weeks. She fully breastfed her infant and her infant appeared well during all checkups.[17]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
2 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808
3 Sarris I, Gandhi S, Koumis A, et al. Pregnancy outcome and safety of breastfeeding in two patients with paroxysmal nocturnal haemoglobinuria (PNH) treated with eculizumab. Arch Dis Child Fetal Neonatal Ed 2012;97:PP.43. doi:10.1136/fetalneonatal-2012-301809.388
4 Ando Y, Kida M, Saika M, et al. Pregnancy and delivery in a PNH patient treated with eculizumab. Rinsho Ketsueki 2014;55:2288–93.25501409
5 Kelly RJ, Hochsmann B, Szer J, et al. Eculizumab in pregnant patients with paroxysmal nocturnal hemoglobinuria. N Engl J Med 2015;373:1032–9.26352814
6 Sharma R, Keyzner A, Liu J, et al. Successful pregnancy outcome in paroxysmal nocturnal hemoglobinuria (PNH) following escalated eculizumab dosing to control breakthrough hemolysis. Leuk Res Rep 2015;4:36–8.26052501
7 Miyasaka N, Miura O, Kawaguchi T, et al. Pregnancy outcomes of patients with paroxysmal nocturnal hemoglobinuria treated with eculizumab: A Japanese experience and updated review. Int J Hematol 2016;103:703–12.26857155
8 Vinogradova M, Kulagin A, Kirsanova T, et al. Pregnancy outcomes in paroxysmal nocturnal hemoglobinuria depending on the therapeutic approach. Br J Haematol 2017;176 (Suppl):94–5. doi:10.1111/bjh.14613
9 Vinogradova MA, Kulagin A, Shmakov R, et al. The pregnancy course and outcomes during targeted therapy of paroxysmal nocturnal hemoglobinuria. Blood 2016;128:2397. doi:10.1182/blood.V128.22.2397.2397
10 Aydin S, Audisio E, Iovino G, et al. Breakthrough hemolysis controlled by eculizumab escalation during pregnancy in paroxysmal noctural hemoglobinuria (PNH): A single case report. Haematologica 2017;102 (Suppl 3):58. http://www.haematologica.org/content/102/s3/1.full.pdf+html
11 Frairia C, Aydin S, Audisio E, et al. Breakthrough hemolysis and thromboembolism controlled by eculizumab during pregnancy in paroxysmal noctural hemoglobinuria (PNH): A single institution experience. HemaSphere 2018;2 (Suppl 2):835–6. doi:10.1097/HS9.0000000000000060
12 Socié G, Caby-Tosi MP, Marantz JL, et al. Eculizumab in paroxysmal nocturnal haemoglobinuria and atypical haemolytic uraemic syndrome: 10-year pharmacovigilance analysis. Br J Haematol 2019;185:297–310.30768680
13 Amisha F, Konda M, Malik P, et al. Clinical-laboratory- genetic profile and outcomes of patients with atypical hemolytic uremic syndrome and restrictive use of eculizumab: A single center experience and a brief review. Blood 2021;138 (Suppl. 1):3159. doi:10.1182/blood-2021-145076
14 Fujimoto T, Maeda Y. Eculizumab use throughout pregnancy in two patients with aquaporin-4-positive neuromyelitis optica spectrum disorder. Clin Exp Neuroimmunol 2024;15:126–9. doi:10.1111/cen3.12784
15 Dereme J., Goodyer M., Baud D., et al. Targeted management of coexistent severe thrombophilias-A case report of a successful pregnancy despite paroxysmal nocturnal hemoglobinuria and hereditary protein C deficiency. EJHaem 2024;5:1048–52.39415927
16 Karaman B, Tunçel R, Ekmekci Ö, et al. Management of refractory generalized myasthenia gravis with eculizumab during pregnancy and puerperium: A case report. Drugs Context 2025;14:2025–5–7.41063713
17 Füreder W, Granser S, Repa A, et al. Ravulizumab exposure in early pregnancy. Ann Hematol 2025;104:6081–4.41081867

## Substance Identification

### Substance Name

Eculizumab

### CAS Registry Number

219685-50-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Dermatologic Agents